# Botulin B

CASRN: 93384-44-2

## Drug Levels and Effects

### Summary of Use during Lactation

No data exist on the medical use of botulin B during breastfeeding. However, it is not detectable systemically after intramuscular use, thus excretion into breast milk is considered unlikely. The closely related drug, onabotulinumtoxinA was not detectable in the milk of two women and detectable in only minute amounts in 5 others after 40 to 92 units injected into the face.[1,2] Infants have been safely breastfed during maternal botulism and no botulinum toxin was detectable in the milk of one mother or in her infant. Breastfeeding appears to protect infants against botulism.[3] No special precautions are required.

### Drug Levels

Maternal Levels. Published information on the medical use of botulin A during breastfeeding was not found as of the revision date.

Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. She was given 2 vials of trivalent botulism antitoxin, 1 intravenously and 1 intramuscularly. A milk sample obtained 3 days after the onset of her illness and 4 hours after administration of botulinum antitoxin had no detectable botulinum toxin nor botulism organisms.[4]

Infant Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. No botulinum toxin was detected in the breastfed infant's blood or stool on the day the mother was admitted to the hospital (3 days after the onset of illness) and no botulism organisms were detected in the infant's stools.[4]

### Effects in Breastfed Infants

Published information on the medical use of botulin A during breastfeeding was not found as of the revision date.

One mother breastfed her infant while she was experiencing toxicity from botulism poisoning. She breastfed her 2-month-old infant. Although the mother died, the infant had no symptoms.[5]

A woman developed botulism after ingesting fermented salmon eggs while breastfeeding her 8-month-old breastfed (extent not stated) infant. The infant developed no signs or symptoms of botulism even though she continued to nurse throughout the mother's hospitalization.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hudson C, Wilson P, Lieberman D, et al. Analysis of breast milk samples in lactating women after undergoing botulinum toxin injections for facial rejuvenation: A pilot study. Facial Plast Surg Aesthet Med 2024;26:523-6.38306172
2 Gu H, Xu Z, Koviazina R, et al. Detection of nontoxic BoNT/A levels in post-facial botox injection breastmilk using a multi-technique approach. bioRxiv 2024. doi:10.1101/2024.05.22.595434
3 Arnon SS, Damus K, Thompson B, et al. Protective role of human milk against sudden death from infant botulism. J Pediatr 1982;100:568-73.7038077
4 Middaugh J. Botulism and breast milk. N Engl J Med 1978;298:343.622098
5 Douthirt C. An outbreak of botulism in Tucumcari, New Mexico. Southwest Med 1938:51-3.

## Substance Identification

### Substance Name

Botulin B

### CAS Registry Number

93384-44-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bacterial Toxins

Neuromuscular Agents

Neurotoxins